# Tapinarof

CASRN: 79338-84-4

## Drug Levels and Effects

### Summary of Use during Lactation

Tapinarof has not been studied during breastfeeding. Because it is poorly absorbed after topical application, it is considered a low risk to the nursing infant.[1] Do not apply tapinarof directly to the nipple and areola and ensure that the infant's skin does not come into direct contact with the areas of skin that have been treated.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Psoriasis) Adalimumab, Certolizumab Pegol, Etanercept, Infliximab, Phototherapy, Tretinoin

### References

1 Yaghi M, McMullan P, Truong TM, et al. Safety of dermatologic medications in pregnancy and lactation: An Update - Part II: Lactation. J Am Acad Dermatol 2024;91:651-68.38280680

## Substance Identification

### Substance Name

Tapinarof

### CAS Registry Number

79338-84-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Dermatological Agents